# Macitentan

CASRN: 441798-33-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of macitentan during breastfeeding. Because macitentan is more than 99% bound to plasma proteins, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be discontinued during macitentan therapy. Macitentan and its active metabolite should be completely eliminated from milk in 10 days.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Nitric Oxide, Sildenafil, Treprostinil

## Substance Identification

### Substance Name

Macitentan

### CAS Registry Number

441798-33-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Vasodilator Agents